# Sargramostim

CASRN: 123774-72-1

## Drug Levels and Effects

### Summary of Use during Lactation

Sargramostim is a slightly modified, glycosylated form of granulocyte-macrophage colony-stimulating factor (GM-CSF). GM-CSF is a normal component of breastmilk, probably generated in milk by breastmilk macrophages.[1,2] However, breastfed infants do not have greater serum GM-CSF serum levels than formula-fed infants and neutrophil activation resulting from GM-CSF is no different between breastfed and formula-fed infants. These lacks of differences are probably because GM-CSF is a large molecule with a molecular weight of 23,000 Da and is probably partly digested in the infant’s gastrointestinal tract and poorly absorbed by the infant. No information is available on the use of intravenous sargramostim in nursing mothers, but breastmilk levels of GM-CSF were not increased in one nursing mother after receiving inhaled sargramostim. Maternal sargramostim is unlikely to adversely affect her breastfed infant.

### Drug Levels

Maternal Levels. Twenty nursing mothers of full-term infants provided milk samples at 5 days postpartum. The average concentration of GM-CSF in their milk was 100 ng/L.[3]

A woman with autoimmune pulmonary alveolar proteinosis caused by GM-CSF autoantibodies was treated with inhaled sargramostim 250 mcg daily. GM-CSF was undetectable in milk both before and 8 hours after receiving inhaled sargramostim.[4]

Infant Levels. Twenty breastfed and 13 formula-fed full-term infants had serum concentration of GM-CSF measured at 5 days of age. Breastfed infants had an average GM-CSF concentration of 33.5 ng/L and formula-fed infants had an average GM-CSF serum concentration of 18.9 ng/L, but this difference was not statistically significant. In addition, no difference was found in neutrophil chemotaxis between the two groups and no correlations were found between GM-CSF concentrations in milk or infants' sera and neutrophil chemotaxis.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Garofalo R. Cytokines in human milk. J Pediatr 2010;156 (2 Suppl):S36-S40.20105664
2 Ichikawa M., Sugita M., Takahashi M., et al. Breast milk macrophages spontaneously produce granulocyte-macrophage colony-stimulating factor and differentiate into dendritic cells in the presence of exogenous interleukin-4 alone. Immunology 2003;108:189-95.12562327
3 Gasparoni A., Chirico G., De Amici M., et al. Granulocyte-marophage colony-stimulating factor in human milk. Eur J Pediatr 1996;155:69.8750819
4 Roach M, Chalk C, Stock J, et al. Risk of autoimmune PAP caused by passive transfer of GM-CSF autoantibodies during breast feeding: A case report. Am J Respir Crit Care Med 2023;207 (Suppl S):A4940. doi:10.1164/ajrccm-conference.2023.207.1_MeetingAbstracts.A4940

## Substance Identification

### Substance Name

Sargramostim

### CAS Registry Number

123774-72-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hematopoietic Cell Growth Factors

Colony-Stimulating Factors

Immunologic Factors